# Nitrogen, Liquid

CASRN: 7727-37-9; 17778-88-0

Chemical structure

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of liquid nitrogen on the skin during breastfeeding. Because it is a nontoxic gas that is unlikely to appear in breastmilk or be absorbed by the infant, it is considered safe to use during breastfeeding. No special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Nitrogen, Liquid

### CAS Registry Number

7727-37-9; 17778-88-0

### Drug Class

- Breast Feeding
- Lactation
- Dermatologic Agents
- Elements
- Gases